# Margetuximab

CASRN: 1350624-75-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of margetuximab during breastfeeding. Because margetuximab is a large protein molecule with a molecular weight of about 149,000, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Until more data become available, margetuximab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. The manufacturer notes that it takes 4 months for margetuximab to be eliminated from the body.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Margetuximab

### CAS Registry Number

1350624-75-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antineoplastic Agents